# Imidapril

CASRN: 89371-37-9

## Drug Levels and Effects

### Summary of Use during Lactation

Imidapril is not marketed in the United States. Because no information is available on the use of imidapril during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Imidapril is an inactive prodrug that is converted to the active drug imidaprilat.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Valsartan

## Substance Identification

### Substance Name

Imidapril

### CAS Registry Number

89371-37-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Angiotensin-Converting Enzyme Inhibitors

Antihypertensive Agents